# Propranolol

CASRN: 525-66-6

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of propranolol in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. Studies during breastfeeding have found no adverse reactions in breastfed infants clearly attributable to propranolol. No special precautions are required. Propranolol has been used successfully in cases of persistent pain of the breast during breastfeeding.[1]

### Drug Levels

The excretion of beta-adrenergic blocking drugs into breastmilk is largely determined by their protein binding. Those with low binding are more extensively excreted into breastmilk.[2] Accumulation of the drugs in the infant is related to the fraction excreted in urine. With 87% protein binding, less than 1% renal excretion and a moderate half-life, propranolol presents a low risk for accumulation in infants.

Maternal Levels. One woman receiving propranolol 20 mg orally every 8 hours had milk propranolol levels between 0 and 5 mcg/L at various times after a dose during days 2 and 5 postpartum.[3]

A woman taking propranolol 10 mg every 8 hours was given a single 40 mg dose. The peak milk level was 30 mcg/L at 2 hours after the dose.[4,5]

Five postpartum women taking oral propranolol 40 mg twice daily had average milk levels of 27 mcg/L (range 14 to 36 mcg/L) at 2 hours after a dose.[6]

Milk propranolol levels were 50 to 60 mcg/L at 3 hours after an 80 mg oral dose in 2 women and 110 to 120 mcg/L in the same women 3 hours after a 160 mg oral dose.[7]

A woman received single oral doses of propranolol 40 mg on two days. Peak propranolol levels in milk were 4 and 9 mcg/L and occurred from 2 to 4 hours after the doses. Subsequently, she began propranolol 40 mg 4 times daily, with peak milk propranolol levels of about 42 mcg/L occurring 3 hours after a dose. Her propranolol dose was increased to 240 mg daily. Thirty days later, her pre-dose and 3-hour post-dose milk propranolol levels were 26 and 64 mcg/L, respectively.[8]

A woman was taking propranolol 20 mg twice daily throughout pregnancy and postpartum. She donated 4 hindmilk samples at various times after her dose. Milk levels ranged from not detectable (<2 mcg/L) at 12 hours after a dose to 20 mcg/L at 1 to 2 hours after a dose.[9]

Three women were studied during the first week postpartum. Two women receiving 1.1 to 1.2 mg/kg daily of oral propranolol had milk concentrations ranging from 14 to 75 mcg/L over the 8-hour period after a dose. In one woman, propranolol glucuronide added slightly to the total propranolol concentration in milk, primarily after 4 hours. A third woman was taking 2.6 mg/kg daily by mouth and had propranolol plus propranolol glucuronide concentrations of 46 to 75 mcg/L in her milk over the time period of 4.5 to 8 hours after her dose.[10]

A fully breastfed infant would receive between <0.1 and 0.9% of the weight-adjusted maternal dosage of propranolol.[10,11]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A study of mothers taking beta-blockers during nursing found a numerically, but not statistically significant increased number of adverse reactions in those taking any beta-blocker. Although the ages of infants were matched to control infants, the ages of the affected infants were not stated. Of 8 mothers taking propranolol, one reported sleepiness in her breastfed infant, but she was also taking other unspecified drugs for hypertension.[12]

A case of bradycardia in a 2-day-old breastfed infant was reported to the French pharmacovigilance system. However it is not clear from the report whether the mother had been taking propranolol near term and might have transmitted the drug to the infant transplacentally.[13]

A prospective study of pregnant patients taking a beta-blocker asked mothers to complete a questionnaire about postpartum breastfeeding and any side effects in their breastfed infants. Sixteen mothers reported taking propranolol in unreported dosages while breastfeeding. Three women reported hypoglycemia in their infant with “a favorable outcome” and one reported bradycardia in her child with discontinuation of propranolol after 3 weeks of breastfeeding.[14]

### Effects on Lactation and Breastmilk

Relevant published information on the effects of beta-blockade or propranolol during normal lactation was not found as of the revision date. A study in 6 patients with hyperprolactinemia and galactorrhea found no changes in serum prolactin levels following beta-adrenergic blockade with propranolol.[15]

### Alternate Drugs to Consider

(Cardiovascular) Labetalol, Metoprolol; (Migraine Prophylaxis) Divalproex, Erenumab, Metoprolol, Nortriptyline, Rimegepant, Topiramate, Valproic Acid

### References

1 Muddana A, Asbill DT, Jerath MR, et al. Quantitative sensory testing, antihistamines, and beta-blockers for management of persistent breast pain: A case series. Breastfeed Med 2018;13:275-80.29630399
2 Riant P, Urien S, Albengres E, et al. High plasma protein binding as a parameter in the selection of betablockers for lactating women. Biochem Pharmacol 1986;35:4579-81.2878668
3 Lewis AM, Patel L, Johnston A, et al. Mexiletine in human blood and breast milk. Postgrad Med J 1981;57:546-7.7329891
4 Levitan AA, Manion JC. Propranolol therapy during pregnancy and lactation. Am J Cardiol 1973;32:247.4721124
5 Anderson PO, Salter FJ. Propranolol therapy during pregnancy and lactation. Am J Cardiol 1976;37:325.1246962
6 Thorley KJ, McAinsh J. Levels of the beta-blockers atenolol and propranolol in the breast milk of women treated for hypertension in pregnancy. Biopharm Drug Dispos 1983;4:299-301.6626704
7 Karlberg B, Lundberg D, Aberg H. Excretion of propranolol in human breast milk. Acta Pharmacol Toxicol (Copenh) 1974;34:222-4.4406326
8 Bauer JH, Pape B, Zajicek J, et al. Propranolol in human plasma and breast milk. Am J Cardiol 1979;43:860-2.425926
9 Taylor EA, Turner P. Anti-hypertensive therapy with propranolol during pregnancy and lactation. Postgrad Med J 1981;57:427-30.7312737
10 Smith MT, Livingstone I, Hooper WD, et al. Propranolol, propranolol glucuronide, and naphthoxylactic acid in breast milk and plasma. Ther Drug Monit 1983;5:87-93.6845404
11 Atkinson HC, Begg EJ, Darlow BA. Drugs in human milk: Clinical pharmacokinetic considerations. Clin Pharmacokinet 1988;14:217-40.3292101
12 Ho TK, Moretti ME, Schaeffer JK, et al. Maternal beta-blocker usage and breast feeding in the neonate. Pediatr Res 1999;45 (4, pt. 2):67A. doi:10.1203/00006450-199904020-00402
13 Soussan C, Gouraud A, Portolan G, et al. Drug-induced adverse reactions via breastfeeding: A descriptive study in the French Pharmacovigilance Database. Eur J Clin Pharmacol 2014;70:1361-6.25183382
14 Freppel R, Gaboriau L, Richardson M, et al. Beta-blockers and breastfeeding: A real-life prospective study. Eur J Clin Pharmacol 2024;80:1937-43.39259357
15 Board JA, Fierro RJ, Wasserman AJ, et al. Effects of alpha- and beta-adrenergic blocking agents on serum prolactin levels in women with hyperprolactinemia and galactorrhea. Am J Obstet Gynecol 1977;127:285-7.556882

## Substance Identification

### Substance Name

Propranolol

### CAS Registry Number

525-66-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Adrenergic Beta-Antagonists

Antiarrhythmics